# Tovorafenib

CASRN: 1096708-71-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of tovorafenib during breastfeeding. Because tovorafenib and its active metabolite are 97.5% bound to plasma proteins, the amount in milk is likely to be low. However, because of its long half-life and potential toxicity in the breastfed infant, the manufacturer recommends that breastfeeding be discontinued during tovorafenib therapy and for 2 weeks after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Tovorafenib

### CAS Registry Number

1096708-71-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Enzyme Inhibitors

Janus Kinase Inhibitors

Protein Kinase Inhibitors

Tyrosine Kinase Inhibitors